# Chloroprocaine

CASRN: 133-16-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of chloroprocaine during breastfeeding. Based on the low excretion of other local anesthetics into breastmilk and the extremely short half-life of chloroprocaine, it is unlikely to adversely affect the breastfed infant. However, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Lidocaine, Ropivacaine

## Substance Identification

### Substance Name

Chloroprocaine

### CAS Registry Number

133-16-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anesthetics, Local